# Metronidazole

CASRN: 443-48-1

## Drug Levels and Effects

### Summary of Use during Lactation

With maternal intravenous and oral therapy, breastfed infants receive metronidazole in doses that are less than those used to treat infections in infants, although the active metabolite adds to the total infant exposure. Plasma levels of the drug and metabolite are measurable, but less than maternal plasma levels. Case reports of Candida infections and diarrhea have been reported, and a comparative trial suggested that oral and rectal colonization with Candida might be more common in infants exposed to metronidazole.

Because of the well demonstrated genotoxicity and mutagenicity in bacteria, carcinogenicity in animals, and possible mutagenicity in humans,[1,2] concern has been raised about exposure of healthy infants to metronidazole via breastmilk. The relevance of these findings have been questioned and no definitive study has yet been performed in humans.

Opinions vary among experts on the advisability of using metronidazole during longer-term therapy while breastfeeding, but some sources recommend discontinuing breastfeeding for 12 to 24 hours after a single dose of 2 grams, but not after lower dosages.[3] Other drugs are available for some conditions that metronidazole is used to treat. Topical or use of metronidazole during breastfeeding is acceptable.[4] The manufacturer of one vaginal product recommends not breastfeeding during treatment and for 2 days after the last dose.

### Drug Levels

Maternal Levels. Ten women were given a single oral dose of metronidazole 200 mg at 5 days postpartum. Milk levels averaged 3.4 mg/L at 4 hours, 2.8 mg/L at 8 hours and 1.3 mg/L at 12 hours (5 women) after the dose.[5]

Seventeen mothers in a randomized study received oral metronidazole 200 mg 3 times daily for 7 days postpartum. Milk metronidazole levels taken at unstated times on day 6 averaged 4.7 mg/L (range 1.1 to 15.2 mg/L).[6]

Three women were given a single 2 gram oral dose of metronidazole for trichomoniasis. Average milk levels were 45.8 mg/L at 2 hours after the dose, 27.9 mg/L at 8 hours after the dose, 19.1 mg/L at 12 hours after the dose, 12.6 mg/L at 18 hours (2 women) and 3.5 mg/L at 36 hours after the dose (2 women). The authors estimated that the infants would receive a total of 25.3 mg over the 48 hours following this dose.[7]

Fifteen women received 200 mg (n = 11) or 400 mg (n = 4) of metronidazole orally 3 times a day for postpartum endometritis 0 to 22 days postpartum. Single milk samples taken after 1 to 9 days of therapy and from 30 minutes to 4 hours after a 200 mg dose contained 1.6 to 12.2 mg/L of metronidazole and 1.1 to 3.8 mg/L of hydroxymetronidazole. Milk samples taken 2 to 3 hours after a 400 mg dose contained 11.6 to 18 mg/L of metronidazole and 2.4 to 6.3 mg/L of hydroxymetronidazole.[8]

Twelve women taking oral metronidazole 400 mg 3 times daily at an average of 4.3 days postpartum had milk samples taken on days 3 and 4 postpartum. Milk levels of metronidazole averaged 15.5 mg/L at 2 hours after the dose, 12.9 mg/L at 4 hours after the dose, 10.6 mg/L at 6 hours after the dose, and 9.1 mg/L at 8 hours after the dose. Milk levels of hydroxymetronidazole averaged 5.5 mg/L at 2 hours after the dose, 5.7 mg/L at 4 hours after the dose, 5.6 mg/L at 6 hours after the dose, and 5.5 mg/L at 8 hours after the dose. The authors estimated that a breastfed neonate ingesting 500 mL of milk daily with this maternal dosage would receive less than 10% of the recommended newborn dosage of metronidazole.[9]

Fifteen women who were 1 month postpartum were given a single intravenous dose of metronidazole 500 mg. The average breastmilk levels at 2 hours after the dose was 7.55 mg/L.[10]

Three postpartum women were treated with intravenous metronidazole 500 mg 3 times daily for 2 days following a cesarean section. The women provided a breastmilk sample 1 to 2 hours after a dose on the second day of therapy. Metronidazole concentrations in milk were 7.3, 9.6 and 10.1 mg/L.[11]

Infant Levels. Ten 5-day-old infants were breastfed every 4 hours after a single 200 mg oral dose of metronidazole was given to their mothers. Two infants had metronidazole serum levels of 0.28 and 0.4 mg/L and 3 had unmeasurable (<0.05 mg/L) levels 8 hours after the dose. Another 2 infants had metronidazole serum levels of 0.2 mg/L and another 3 had unmeasurable (<0.05 mg/L) levels 12 hours after the dose.[5]

Breastfed newborn infants whose mothers were taking oral metronidazole 3 times daily had blood samples taken 1 to 2 hours after a maternal dose. Eleven infants whose mothers were taking a dose of 600 mg daily had plasma metronidazole levels averaging 0.8 mg/L (range 0.3 to 1.4 mg/L) and hydroxymetronidazole levels averaging 0.4 mg/L (range 0.1 to 0.8 mg/L). Four infants whose mothers were taking 1200 mg daily had plasma metronidazole levels averaging 2.4 mg/L (range 0.6 to 4.9 mg/L) and hydroxymetronidazole levels averaging 1.1 mg/L (range 0.4 to 2.3 mg/L). The infants had plasma metronidazole levels ranging from 4 to 32% of maternal plasma levels and plasma hydroxymetronidazole ranging from 8 to 96% of maternal plasma levels.[8]

Seven breastfed infants whose mothers were taking oral metronidazole 400 mg 3 times daily had serum levels measured 4 to 8 hours after a maternal dose and 30 to 90 minutes after breastfeeding. Their average plasma levels were 1.6 mg/L for metronidazole and 1.4 mg/L for hydroxymetronidazole. These levels corresponded to 12.5% and 25.6% of maternal metronidazole and hydroxymetronidazole plasma levels, respectively.[9]

### Effects in Breastfed Infants

None of ten 5-day-old infants who were breastfed every 4 hours after a single maternal 200 mg oral dose of metronidazole had any signs of oral or gastrointestinal upset during the 12-hour study period.[5]

Sixteen newborn breastfed infants (aged 0 to 22 days) of mothers receiving 200 mg or 400 mg of oral metronidazole 3 times daily reportedly suffered no observable adverse reactions during the 9 days of the study.[8]

A case of diarrhea and secondary lactose intolerance was possibly caused by metronidazole in breastmilk transmitted to the infant in the early neonatal period.[12]

In a controlled, comparative study, 35 newborn infants were monitored for 10 days during maternal therapy with metronidazole and another antibiotic (33 ampicillin, 1 erythromycin and 1 cephalexin) for postpartum infection or prophylaxis. Dosages and routes of administration were not stated, but some mothers received the drugs intravenously initially and then were switched to oral therapy. Compared to infants of mothers who received ampicillin alone or no antibiotics, more infants exposed to metronidazole and ampicillin had very loose stools than in the other groups, especially when the drugs were given intravenously. More frequent and heavier growth of Candida species was found in the oral and perianal swabs of metronidazole-exposed infants, but this did not quite reach statistical significance (p=0.053). One infant exposed to metronidazole and ampicillin developed oral thrush. No differences were found between the groups in diaper rash, feeding problems or weight gain to the time of discharge.[9]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Anaerobic bacterial infections) Amoxicillin and Clavulanic Acid, Clindamycin, Doxycycline; (Giardiasis) Tinidazole; (Topical for Rosacea) Azelaic Acid; (Vaginal) Clindamycin

### References

1 Dobiáš L, Černá M, Rössner P, et al. Genotoxicity and carcinogenicity of metronidazole. Mutat Res 1994;317:177–94.7515153
2 Bendesky A, Menendez D, Ostrosky-Wegman P. Is metronidazole carcinogenic? Mutat Res 2002;511:133–44.12052431
3 Workowski KA, Bachmann LH, Chan PA, et al. Sexually transmitted infections treatment guidelines, 2021. MMWR Recomm Rep 2021;70:1–187.34292926
4 Lyons CE, Smith AD., Schwartzman G., et al. Managing skin diseases that flare during pregnancy and in the postpartum period: Part 2- Management & safety considerations. J Am Acad Dermatol 2026 41692217
5 Gray MS, Kane PO, Squires S. Further observations on metronidazole (Flagyl). Br J Vener Dis 1961;37:278–9.13901320
6 Anon. An evaluation of metronidazole in the prophylaxis of anaerobic infections in obstetrical patients. J Antimicrob Chemother 1978;4:55–62.357408
7 Erickson SH, Oppenheim GL, Smith GH. Metronidazole in breast milk. Obstet Gynecol 1981;57:48–50.7454176
8 Heisterberg L, Branebjerg PE. Blood and milk concentrations of metronidazole in mothers and infants. J Perinat Med 1983;11:114–20.6854509
9 Passmore CM, McElnay JC, Rainey EA, et al. Metronidazole excretion in human milk and its effect on the suckling neonate. Br J Clin Pharmacol 1988;26:45–51.3203060
10 Zhang Y, Zhang Q, Xu Z. Tissue and body fluid distribution of antibacterial agents in pregnant and lactating women. Zhonghua Fu Chan Ke Za Zhi 1997;32:288–92.9596854
11 Geballa-Koukoula A, Panderi I, Zervas K, et al. A porous graphitized carbon LC-ESI/MS method for the quantitation of metronidazole and fluconazole in breast milk and human plasma. J Chromatogr B Analyt Technol Biomed Life Sci 2018;1084:175–84.29604616
12 Clements CJ. Metronidazole and breast feeding. N Z Med J 1980;92:329.6934434

## Substance Identification

### Substance Name

Metronidazole

### CAS Registry Number

443-48-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Antiprotozoal Agents

Nitroimidazoles